# Pegvaliase

CASRN: 1585984-95-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pegvaliase during breastfeeding, but amounts in milk appear to be trivial. Absorption of the drug by the infant from breastmilk is unlikely because it is a polypeptide that is probably destroyed in the infant's gastrointestinal tract. Professional guidelines support the use of pegvaliase during breastfeeding.[1] Polyethylene glycol is not excreted into breastmilk.[2] Pegvaliase may decrease the phenylalanine content of breastmilk. The manufacturer recommends monitoring blood phenylalanine concentrations in breastfeeding women treated with pegvaliase.

### Drug Levels

Maternal Levels. A woman with phenylketonuria stopped her pegvaliase during pregnancy and for 7 months while breastfeeding her infant. After weaning, she restarted pegvaliase and pumped breastmilk samples for analysis while taking a dose of 20 mg daily. The activity of phenylalanine ammonia lyase (the active portion of pegvaliase) was equal to background levels found in blank breastmilk and TRIS buffer solution.[3] In her second pregnancy, pegvaliase was measured in breastmilk at four time points when she was receiving 80, 110 and 140 mg of pegvaliase weekly. No sample had any detectable pegvaliase activity.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with phenylketonuria reinstituted pegvaliase therapy when her infant was 2 weeks old. She began with a dose of 10 mg per week on day 12 postpartum, then increased to 70 mg per week on day 27 postpartum, 140 mg per week on day 46 postpartum. The dosage was reduced to 80 mg weekly on day 55 postpartum, then increased to 110 mg weekly on day 97 postpartum, where it remained. She breastfed her infant twice daily and the infant gained weight normally and met developmental milestones. Mental development was average at 14 months of age.[4]

A woman with phenylketonuria had an unplanned pregnancy while taking pegvaliase. Postpartum, she received a dose of 120 mg per week while exclusively breastfeeding her infant. At 5 months of age, her infant was developing normally with no concerns.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Cunningham A, Rohr F, Splett P, et al. Nutrition management of PKU with pegvaliase therapy: Update of the web-based PKU nutrition management guideline recommendations. Orphanet J Rare Dis 2023;18:155.37349772
2 Clowse ME, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890-6.28814432
3 Rohr F, Kritzer A, Harding CO, et al. Discontinuation of pegvaliase therapy during maternal PKU pregnancy and postnatal breastfeeding: A case report. Mol Genet Metab Rep 2020;22:100555.31956506
4 Rohr F, Wessel A, Harding CO, et al. Reinstitution of pegvaliase therapy during lactation. Mol Genet Metab Rep 2022;33:100938.36420422
5 Kopesky JJ, Hessenthaler CM, Lewis GM. P. 17 Successful outcomes with continued pegvaliase-pqpz treatment throughout pregnancy and lactation in a PKU patient. Mol Genet Metab 2024;141:18. doi:10.1016/j.ymgme.2024.108383

## Substance Identification

### Substance Name

Pegvaliase

### CAS Registry Number

1585984-95-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Lyases

Recombinant Proteins

Phenylalanine Ammonia Lyase,